# Ampicillin and Sulbactam

CASRN: 94935-63-4

## Drug Levels and Effects

### Summary of Use during Lactation

Ampicillin-sulbactam produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally, disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush, have been reported with penicillins, but these effects have not been adequately evaluated. Ampicillin-sulbactam is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. In 3 mothers who received intramuscular ampicillin 2 grams daily, milk levels ranged from 0.3 to 0.9 mg/L. In 3 mothers who received 4 grams daily intramuscularly, milk levels ranged from 0.4 to 0.9 mg/L. In all cases, peak milk levels occurred 3 hours after the dose. The breastfed infant was estimated to receive from 0.08 to 0.2 mg daily of ampicillin with these doses.[1]

In 15 women receiving ampicillin 500 mg 4 times daily by intramuscular injection, average milk ampicillin levels were as follows: 0.11 mg/L at 30 minutes after the injection; 0.21 mg/L at 1 hour, 0.17 at 2 hours, 0.27 mg/L at 4 hours and 0.26 mg/L at 6 hours after the injection.[2]

In 15 women given a single 2 gram dose of ampicillin intravenously, milk levels averaged 1.1 mg/L at 2 hours after the dose.[3]

A study in postpartum women with endometritis who received ampicillin 1 gram plus sulbactam 0.5 gram or ampicillin 2 grams plus 1 gram of sulbactam infused intravenously over 20 minutes found the average milk levels of ampicillin to be 1.7 mg/L with the highest level observed 3 mg/L. Sulbactam milk levels averaged 0.58 mg/L with the highest level observed 2.8 mg/L.[4]

Milk was collected at random times after 0.5 or 1 gram doses of sulbactam infused intravenously over 20 minutes. Little fluctuation occurred in milk levels over the first 8 hours after the dose with little difference in milk levels between the two dosages. Milk levels averaged 0.52 mg/L during this period with the highest level being 2.8 mg/L. Other levels from 10.5 to 20.5 hours after the dose ranged from 0.12 to 1.2 mg/L.[5] It is unclear whether some of the patients in this report were the same as those in reference[4].

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information on ampicillin and sulbactam was not found as of the revision date; however, there are data on ampicillin alone. In a prospective follow-up study, 5 nursing mothers reported taking oral ampicillin (dosage unspecified). One mother reported diarrhea in her infant. No rashes or candidiasis were reported among the exposed infants.[6]

A small, controlled, prospective study had mothers taking ampicillin monitor their infants for signs of adverse effects (furring of the tongue, feeding difficulties, changes in stool frequency and consistency, diaper rash, and skin rash). Weight change and the development of jaundice were also recorded. No statistical differences in these parameters were found between the infants of the control mothers and those of mothers taking oral ampicillin.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pons G, Rey E. Antibiotics excretion in breast milk. Med Mal Infect 1994;24 (Special Issue 1):1088-106.
2 Amiraslanova LA, Emel'yanova AI, Fursova SA, et al. Some aspects of ampicillin, kanamycin and cefuroxim pharmacokinetics in puerperant patients with endometritis. Akush Ginekol (Mosk) 1985;10 14-7.2934996
3 Zhang Y, Zhang Q, Xu Z. Tissue and body fluid distribution of antibacterial agents in pregnant and lactating women. Zhonghua Fu Chan Ke Za Zhi 1997;32:288-92.9596854
4 Foulds G, Miller RD, Stankewich JP, et al. The pharmacokinetics of subactam and ampicillin in postpartum women. In, Spitzy KH, Karrer K, eds. Proc 13th Int Congress Chemother 1983;1:23/17-23/22.
5 Foulds G, Miller D, Knirsch AK, et al. Sulbactam kinetics and excretion into breast milk in postpartum women. Clin Pharmacol Ther 1985;38:692-6.2998677
6 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418
7 Campbell AC, McElnay JC, Passmore CM. The excretion of ampicillin in breast milk and its effect on the suckling infant. Br J Clin Pharmacol 1991;31:230p. doi:10.1111/j.1365-2125.1991.tb05523.x

## Substance Identification

### Substance Name

Ampicillin and Sulbactam

### CAS Registry Number

94935-63-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Anti-Bacterial Agents

Penicillins

beta-Lactamase Inhibitors